# Stinging Nettle

## Drug Levels and Effects

### Summary of Use during Lactation

Stinging nettle (Urtica dioica and Urtica urens) preparations have been used in nursing mothers orally as a postpartum as a "tonic" for treating anemia.[1,2] It is also a purported galactogogue.[2-8] Hypothetically, a galactogogue effect might be due to the binding of sex hormone-binding globulin by polar extracts of Urtica dioica causing elevated serum estrogen levels, by histamine-induced prolactin release, or by serotonin-induced release of thyrotropin-releasing hormone.[9] Only minimal scientific support for a galactogogue effect of stinging nettle exists. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[10] Although stinging nettle is generally well tolerated in adults, topical use can cause urticaria when applied topically, and application on one mother's nipple resulted in allergic skin rash in her breastfed infant. It is probably best not to apply stinging nettle topically to the breast while breastfeeding.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 17-day-old exclusively breastfed infant was admitted to the hospital with an urticarial rash on the chest, back, and upper extremities. The infant's mother had reportedly applied water boiled with stinging nettles for cracked nipple twice a day before and after each breastfeeding for 2 days. Total IgE and specific IgE levels for stinging nettle were high in the mother and infant. The infant's rash improved upon cessation of breastfeeding. Breastfeeding was resumed 2 days later without the use of stinging nettle on the nipple and the rash did not recur. At 2 months of age, skin prick testing in the infant was positive for stinging nettle, but no other allergen tested positive.[11] Stinging nettle exposure was the probable cause of the rash.

### Effects on Lactation and Breastmilk

Single cases of gynecomastia in a man and galactorrhea in a woman were reported after ingesting nettle as a tea for 4 weeks prior to seeking medical advice. Serum hormones were normal in the man, but in the woman serum estradiol was very high, prolactin was slightly elevated, and LH and FSH were low. Both conditions reversed 4 to 6 weeks after stopping the tea. The case reports were from Türkiye where ingestion of nettle is common. No analysis of the tea was performed to test for foreign substances.[12] The relevance of these findings with respect to breastfeeding are not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as melissa, caraway, anise, fennel, goat's rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mother used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[13] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

A woman was taking Urtica dioica 500 mg (number of daily doses not stated) for environmental allergies. She was also taking Echinacea intermittently and had a contraceptive implant of etonogestrel in place for the past 1.5 years. She had begun the stinging nettle about 1 month prior to noticing an intermittent colostrum-like discharge from both breasts. Serum prolactin, thyroid-stimulating hormone, and a metabolic panel were all were within normal limits. One week after discontinuing the stinging nettle supplement, her galactorrhea resolved.[9]

A blinded, triple-arm study compared the effects of cumin (Cuminum cyminum) drops, stinging nettle (Urtica dioica) drops, and placebo on several markers of lactation adequacy in healthy multiparous mothers with 10- to 15-day-old term infants. Fifteen drops of the preparations were given three times a day for 4 weeks. The method of preparation and content of the drops were not stated, but they were prepared especially for this study and not commercially available. The tastes and colors of the preparations may have compromised the blinding of the study; the placebo had no taste but the taste and colors of the other preparations were not stated. At the end of the study, both the cumin and nettle groups had greater weight gains, higher feeding frequencies, more wet diapers, a higher weight of diapers, and more frequent defecation in the two treatment groups. Furthermore, these parameters were statistically greater in the cumin group than in the nettle group. No side effects were reported by the mothers.[14]

A meta-analysis of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that There is low certainty evidence that ‘Hipp Natal®’ granules (containing 1% stinging nettle, Pimpinella anisum and five other herbs) increased milk volume at day 7.[15]

### References

1 Dennehy C, Tsourounis C, Bui L, et al. The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs 2010;39:684–93.21044150
2 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38–9.16320878
3 Petrie KA, Peck MR. Alternative medicine in maternity care. Prim Care 2000;27:117–36.10739460
4 Belew C. Herbs and the childbearing woman. Guidelines for midwives. J Nurse Midwifery 1999;44:231–52.10380443
5 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93–100. doi:10.1089/act.1997.3.93
6 Abascal K, Yarnell E. Botanical galactagogues. Altern Complement Ther 2008;14:288–94. doi:10.1089/act.2008.14602
7 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
8 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
9 Easton L, Vaid S, Nagel AK, et al. Stinging nettle (Urtica dioica): An unusual case of galactorrhea. Am J Case Rep 2021;22:e933999.34876549
10 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
11 Uslu S, Bulbul A, Diler B, et al. Urticaria due to Urtica dioica in a neonate. Eur J Pediatr 2011;170:401–3.20953796
12 Sahin M, Yilmaz H, Gursoy A, et al. Gynaecomastia in a man and hyperoestrogenism in a woman due to ingestion of nettle (Urtica dioica). N Z Med J 2007;120:U2803.18264183
13 Özalkaya E, Aslandogdu Z, Ozkoral A, et al. Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38–42.29411721
14 Farshad F, Sahebzad ES, Kheirkhah M, et al. Comparison of the effect of Cumin cyminum and nettle oral drops on the breast milk sufficiency indicators in new mothers. Sultan Qaboos Univ Med J 2024;24:209–15.38828258
15 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450

## Substance Identification

### Substance Name

Stinging Nettle

### Scientific Name

Urtica dioica; Urtica urens

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal